# Delgocitinib

CASRN: 1263774-59-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of delgocitinib during breastfeeding. Because delgocitinib cream is only applied topically to the hands, the amount in milk is likely to be low. To minimize potential infant exposure, avoid direct contact with the nipple and surrounding area immediately after applying delgocitinib cream to the hands or wrists.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Delgocitinib

### CAS Registry Number

1263774-59-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Breast Feeding

Enzyme Inhibitors

Janus Kinase Inhibitors

JAK Inhibitors